# Aripiprazole

CASRN: 129722-12-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of aripiprazole up to 15 mg daily produce low levels in milk. Aripiprazole can lower serum prolactin in a dose-related manner, and cases of poor milk supply and lactation cessation have been reported. Weight loss and poor weight gain have been reported in breastfed infants whose mothers were taking aripiprazole. Monitor the breastfed infant for dehydration and lack of appropriate weight gain. Cases of gynecomastia and galactorrhea have also been reported. Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.[1]

### Drug Levels

Maternal Levels. A woman who was 6 months postpartum was taking aripiprazole 15 mg by mouth daily. Milk levels after 11 and 12 days of therapy (times not stated) at that dose were 13 and 14 mcg/L.[2]

A woman took aripiprazole 15 mg daily by mouth during pregnancy and postpartum. At 3 days postpartum, aripiprazole was not detectable in colostrum because of an unknown substance that interfered with the assay. On day 27 postpartum, 3 additional milk samples were collected 30 minutes before the dose (24 hours after the last dose), and 4 and 10 hours after the dose. The drug and its metabolite were undetectable (<10 mcg/L) in all samples. The authors estimated that a fully breastfed infant would receive less than 0.7% of the maternal weight-adjusted dosage.[3]

A woman was taking aripiprazole 18 mg daily. On day 6 postpartum, a breastmilk sample (time not reported) contained a concentration of aripiprazole of 38.7 mcg/L.[4]

A woman took aripiprazole 10 mg daily by mouth beginning in week 9 of pregnancy and continuing postpartum. Mid-nursing milk samples were obtained at 8 and 10 weeks postpartum over a 24-hour period after the dose. Aripiprazole and dehydroaripiprazole were measured in the milk. On the first sampling day, mean milk concentrations were 52.6 mcg/L of aripiprazole and 8.8 mcg/L for the metabolite. On the second day, mean milk concentrations were 53.6 and 6.3 mcg/L, respectively. The authors calculated that a 5 kg infant would receive a daily dose of 47 mcg daily and the weight-adjusted dosage would be 8.3% of the maternal dosage.[5]

An abstract reported that a relative infant dose of 12.7% was found in nursing mother(s) taking aripiprazole who provided 8 milk samples over 24 hours, but other details were not supplied.[6]

Two patients were treated with aripiprazole 5 or 10 mg daily. Aripiprazole concentrations in milk were 9.6 and 28.6 mcg/L at unspecified milk collection times.[7]

Infant Levels. A woman was taking aripiprazole 18 mg daily during pregnancy and postpartum. On day 6 her breastfed infant had a serum concentration of 7.6 mcg/L, although some portion of the concentration could have been residual from transplacental transmission because of the drug's on half-life.[4]

### Effects in Breastfed Infants

A woman took aripiprazole 15 mg daily by mouth during pregnancy and postpartum. She breastfed her infant (amount not stated) and at 3 months of age, the infant was growing normally.[3]

A woman took aripiprazole 10 mg daily by mouth beginning in week 9 of pregnancy and continuing postpartum. She exclusively breastfed her infant for 6 weeks, then was partially breastfed. At 4 months of age the infant was still breastfeeding and had normal psychomotor and behavioral development and had reached the expected milestones for her age.[5]

A 12-day-old exclusively breastfed male infant presented with severe weight loss and hypernatremic dehydration because of inadequate milk intake and a 30% weight loss since birth. The infant's mother was being treated for bipolar disorder with lamotrigine 250 mg orally once daily, aripiprazole 15 mg orally once daily, and sertraline 100 mg orally once daily. She was also taking levothyroxine 50 mcg once daily, a prenatal multivitamin, and folic acid. On initial evaluation in the emergency department, he was pale, with marbled skin, dry mucous membranes, decreased skin turgor, and bluish feet with prolonged capillary refill. The right foot eventually became darker with blackened toes, and he developed gangrene of the right lower limb, which did not respond to medical therapy and required amputation of all five toes and surgical debridement of the metatarsals. Necrosis was attributed to arterial microthrombi caused by disseminated intravascular coagulation after severe dehydration. The authors considered the mother's medications as a possible cause of the dehydration and related problems.[8]

A woman with paranoid schizophrenia had been receiving long-acting injectable aripiprazole 400 mg every 28 days for 32 months when pregnancy was confirmed. The dose was lowered to 300 mg every 28 days and after delivery she breastfed her infant (extent and duration not stated). At 3 years of age, the infant’s growth and development were normal.[9]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[10] The number of women taking aripiprazole was not reported.

### Effects on Lactation and Breastmilk

Unlike the phenothiazines, aripiprazole has a minimal effect on serum prolactin levels and it has been used to reverse hyperprolactinemia in nonlactating patients taking other antipsychotics.[11-22] Case reports of both decreased lactation in nursing mothers and cases of hyperprolactinemia and galactorrhea in patients taking aripiprazole have been reported.[23-32] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

One woman began taking aripiprazole 10 mg daily at week 20 of pregnancy. She underwent a cesarean section delivery at term, but was unable to establish lactation. The authors suggested that more data are needed to determine if aripiprazole adversely affects lactation.[33]

A woman took aripiprazole 10 mg daily by mouth beginning in week 9 of pregnancy and continuing postpartum. She exclusively breastfed her infant for 6 weeks, but then began supplementation because of insufficient milk production. Her serum prolactin was 35 to 40 mcg/L, which is lower than expected for a nursing mother. The authors speculated that the aripiprazole might have been the cause of her low serum prolactin and diminished her milk supply.[5]

A woman with bipolar disorder was taking lithium during pregnancy and postpartum. At 10 days postpartum, her infant's serum lithium level was 0.26 mmol/L, so lithium was discontinued. Quetiapine was begun, but discontinued because of maternal sedation. Aripiprazole 2.5 mg daily was begun and within 24 hours, the mother noted a marked decrease in milk supply. After 2 weeks of working with a lactation consultant, she continued to have lactation difficulties, and she switched back to lithium. Within 48 hours, her milk supply improved markedly.[34]

A retrospective study of outpatients receiving an average aripiprazole dose of 17.3 mg daily (n = 20) or another antipsychotic (n = 141) found that those receiving such high-dose aripiprazole had an 81% chance of having hypoprolactinemia. Patients not treated with aripiprazole had only a 2.9% chance of having hypoprolactinemia.[35]

The breastfeeding mother of a 5-week-old infant was diagnosed with bipolar disorder, panic attacks and anxiety disorder. She was started on hydroxyzine 50 mg at an unspecified interval and took it for 3 to 5 days with no effect on milk production. She then started on aripiprazole 5 mg at an unspecified interval. After 5 days, she reported a decrease in milk production that required supplementation with formula. Nine days after stopping both drugs, her milk supply returned to normal. The decreased milk supply was possibly caused by the medications, with aripiprazole most likely.[28]

A woman with chronic depression was treated throughout pregnancy with extended-release venlafaxine 225 mg daily. She gave birth by cesarean section at 36.5 weeks and began to breastfeed her infant. The infant was not nursing adequately, but the mother pumped milk after each feeding and used it to supplement the infant. It was estimated that she was producing at least 900 mL of milk daily. By 8 days postpartum, she began to experience depression and aripiprazole 2 mg daily, which she had taken before pregnancy, was added to her regimen. After 3 days of combined therapy, she noticed a decrease in milk supply, and withing 21 days, lactation had ceased completely. Either aripiprazole or the combination with venlafaxine possibly caused a decrease in milk supply.[29]

A woman with major depressive disorder received duloxetine 40 mg twice daily. After 2 weeks, she developed menstrual irregularities and a milky discharge from her breasts. Her serum prolactin was elevated at 205 mcg/L. The duloxetine dosage was decreased to 60 mg once daily and aripiprazole was begun at 2.5 mg daily and then increased to 5 mg daily. Within 2 weeks, galactorrhea had stopped, and the serum prolactin had decreased to 118 mcg/L. Six weeks later, serum prolactin was 39 mcg/L. The combination was continued for another 39 weeks with no return of galactorrhea.[36]

A postpartum woman was given sertraline 200 mg daily for anxiety, depressive symptoms, hypocondriform thoughts and checking compulsions, which interfered with bonding. Two months later aripiprazole 5 mg daily was added. Two to three days later the patient reported decreased milk production. Prolactin levels decreased from a previous 30.18 mcg/L to 5.02 mcg/L. Milk production normalized in less than a week after stopping aripiprazole.[37]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[10] The number of women taking aripiprazole was not reported.

Two women took aripiprazole during pregnancy and postpartum for schizophrenia in doses of 10 and 20 mg daily. Neither mother could breastfeed her infant because of little to no milk production.[38]

A chart review was performed on women treated at an outpatient perinatal psychiatry service in India over a 5-year period who were taking aripiprazole during pregnancy and postpartum. The authors found that only 5 of 35 women taking aripiprazole reported normal lactation. Twenty-six (74%) had complete lactation failure, and 4 (11%) had insufficient milk production.[39]

A multicenter, retrospective electronic chart review identified 34 patients taking aripiprazole while breastfeeding. Twenty-one cases had documented ‘low milk production’, but the cause was generally not identified. Twenty-three (73.5%) women ceased breastfeeding by the last midwife appointment. Eight (23.5%) were supplementing breastfeeding with artificial feeds. Only one mother was able to exclusively breastfeed. The data also suggest the adverse effect on lactation may be dose related. The mothers who were able to continue breastfeeding (including partial supplementation) were taking lower median doses of aripiprazole (10 to 12 mg daily compared to 15 mg daily in those who ceased breastfeeding), suggesting a dose-response relationship.[40]

A review of the FDA’s FAERS database analyzed 6,195 reports of drug-induced galactorrhea in all patient populations. Aripiprazole had the third-highest report count (198) of all drugs reported.[41]

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
2 Schlotterbeck P, Leube D, Kircher T, et al. Aripiprazole in human milk. Int J Neuropsychopharmacol 2007;10:433.17291382
3 Lutz UC, Hiemke C, Wiatr G, et al. Aripiprazole in pregnancy and lactation: A case report. J Clin Psychopharmacol 2010;30:204–5.20520299
4 Watanabe N, Kasahara M, Sugibayashi R, et al. Perinatal use of aripiprazole: A case report. J Clin Psychopharmacol 2011;31:377–9.21532364
5 Nordeng H, Gjerdalen G, Brede WR, et al. Transfer of aripiprazole to breast milk: A case report. J Clin Psychopharmacol 2014;34:272–5.24525642
6 Monfort A, Jutras M, Martin B, et al. New data on the transfer of untested medication into breast milk. Birth Defects Res 2021;113:831. doi:10.1002/bdr2.1928
7 Le Marois M, Doudka N, Tzavara E, et al. Simultaneous quantification of psychotropic drugs in human plasma and breast milk and its application in therapeutic drug monitoring and peripartum treatment optimization. Ther Drug Monit 2024;46:227–36.37684719
8 Morin C, Chevalier I. Severe hypernatremic dehydration and lower limb gangrene in an infant exposed to lamotrigine, aripiprazole, and sertraline in breast milk. Breastfeed Med 2017;12:377–80.28481632
9 Fernández-Abascal B, Recio-Barbero M, Sáenz-Herrero M, et al. Long-acting injectable aripiprazole in pregnant women with schizophrenia: A case-series report. Ther Adv Psychopharmacol 2021;11:2045125321991277.35186259
10 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511–6.34318375
11 Boggs AA, Bihday C, Boggs DL. Aripiprazole's effects on risperidone consta induced hyperprolactinemia: A case report. J Pharm Pract 2012;25:298. doi:10.1177/0897190012441353
12 Byerly MJ, Marcus RN, Tran QV, et al. Effects of aripiprazole on prolactin levels in subjects with schizophrenia during cross-titration with risperidone or olanzapine: Analysis of a randomized, open-label study. Schizophr Res 2009;107:218–22.19038534
13 Goodnick PJ, Rodríguez L, Santana O. Antipsychotics: Impact on prolactin levels. Expert Opin Pharmacother 2002;3:1381–91.12387684
14 Kane JM, Carson WH, Saha AR, et al. Efficacy and safety of aripiprazole and haloperidol versus placebo in patients with schizophrenia and schizoaffective disorder. J Clin Psychiatry 2002;63:763–71.12363115
15 Rocha FL, Hara C, Ramos MG. Using aripiprazole to attenuate paliperidone-induced hyperprolactinemia. Prog Neuropsychopharmacol Biol Psychiatry 2010;34:1153–4.20547197
16 van Kooten M, Arends J, Cohen D. Preliminary report: A naturalistic study of the effect of aripiprazole addition on risperidone-related hyperprolactinemia in patients treated with risperidone long-acting injection. J Clin Psychopharmacol 2011;31:126–8.21192158
17 Kelly DL, Powell MM, Wehring HJ, et al. Adjunct aripiprazole reduces prolactin and prolactin-related adverse effects in premenopausal women with psychosis: Results from the DAAMSEL clinical trial. J Clin Psychopharmacol 2018;38:317–26.29912799
18 Besag FMC, Vasey MJ, Salim I. Is adjunct aripiprazole effective in treating hyperprolactinemia induced by psychotropic medication? A narrative review. CNS Drugs 2021;35:507–26.33880739
19 Ranjbar F, Sadeghi-Bazargani H, Niari Khams P, et al. Adjunctive treatment with aripiprazole for risperidone-induced hyperprolactinemia. Neuropsychiatr Dis Treat 2015;11:549–55.25784810
20 Shim JC, Shin JG, Kelly DL, et al. Adjunctive treatment with a dopamine partial agonist, aripiprazole, for antipsychotic-induced hyperprolactinemia: a placebo-controlled trial. Am J Psychiatry 2007;164:1404–10.17728426
21 Lee BH, Kim YK, Park SH. Using aripiprazole to resolve antipsychotic-induced symptomatic hyperprolactinemia: A pilot study. Prog Neuropsychopharmacol Biol Psychiatry 2006;30:714–7.16571367
22 Lu ML, Shen WW, Chen CH. Time course of the changes in antipsychotic-induced hyperprolactinemia following the switch to aripiprazole. Prog Neuropsychopharmacol Biol Psychiatry 2008;32:1978–81.18848860
23 Mendhekar DN, Andrade C. Galactorrhea with aripiprazole. Can J Psychiatry 2005;50:243.15898468
24 Gunes S. Hyperprolactinemic galactorrhea as a side effect of aripiprazole: An adolescent case (aripiprazole-related hyperprolactinemic galactorrhea). J Clin Psychopharmacol 2018;38:161–2.29360652
25 Ruffatti A, Minervini L, Romano M, et al. Galactorrhea with aripiprazole. Psychother Psychosom 2005;74:391–2.16244518
26 Guler G, Kutuk MO, Kara H. Amenorrhea as a side effect of low dose aripiprazole: An adolescent case. Clin Psychopharmacol Neurosci 2018;16:343–5.30121986
27 Suzuki H, Hibino H, Inoue Y, et al. A patient with schizophrenia who lactated owing to mastopathy during aripiprazole once-monthly 300 mg treatment. International Medical Journal: IMJ 2018;25:90–1.
28 Yskes R, Thomas R, Nagalla ML. A case of decreased milk production associated with aripiprazole. Prim Care Companion CNS Disord 2018;20:18l02303.
29 Walker T, Coursey C, Duffus ALJ. Low dose of Abilify (aripiprazole) in combination with Effexor XR (venlafaxine HCl) resulted in cessation of lactation. Clin Lact (Amarillo) 2019;10:56–9. doi:10.1891/2158-0782.10.2.56
30 Öztürk M, Sapmaz Ş Y, Özkan Y, et al. Aripiprazole elevated the thyroid-stimulating hormone level and is associated with hyperprolactinemia. J Clin Psychopharmacol 2020;40:424–5.32639299
31 Lorenz RA, Weinstein B. Resolution of haloperidol-induced hyperprolactinemia with aripiprazole. J Clin Psychopharmacol 2007;27:524–5.17873694
32 Komaroff A. Aripiprazole and lactation failure: The importance of shared decision making. A case report. Case Rep Womens Health 2021;30:e00308.33796446
33 Mendhekar DN, Sunder KR, Andrade C. Aripiprazole use in a pregnant schizoaffective woman. Bipolar Disord 2006;8:299–300.16696834
34 Frew JR. Psychopharmacology of bipolar I disorder during lactation: A case report of the use of lithium and aripiprazole in a nursing mother. Arch Womens Ment Health 2015;18:135–6.25352315
35 Lozano R, Marin R, Santacruz MJ. Prolactin deficiency by aripiprazole. J Clin Psychopharmacol 2014;34:539–40.24911440
36 Luo T, Liu QS, Yang YJ, et al. Aripiprazole for the treatment of duloxetine-induced hyperprolactinemia: A case report. J Affect Disord 2019;250:330–2.30875676
37 Mantilla Reyes MF, Ximenez De Embun Ferrer I, Roca Lecumberri A, et al. Aripiprazole and hypogalactorrhea in postpartum. Eur Psychiatry 2020;63 (Suppl 1):S488. doi:10.1192/j.eurpsy.2020.6
38 Sahoo MK, Biswas H, Grover S. Safety profile of aripiprazole during pregnancy and lactation: Report of 2 cases. Turk Psikiyatri Derg 2023;34:133–5.37357900
39 Nanjundaswamy MH, Shah A, Lotlikar S, et al. Lactation-related side effects of aripiprazole: A study from perinatal psychiatry services in India. J Clin Psychopharmacol 2025;45:258–66.40199262
40 Spann G, Estevam L, Hussey S, et al. Aripiprazole and breastfeeding: A retrospective, multi-site, case series. Australas Psychiatry 2026;34:183–8.41213898
41 Liu Y, Hu D, Lu Y, et al. Global large-scale real-world assessment of drug-associated galactorrhea based on FDA adverse drug reaction reports. Pak J Pharm Sci 2026;39:1–9.41482770

## Substance Identification

### Substance Name

Aripiprazole

### CAS Registry Number

129722-12-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents